# Octreotide

CASRN: 83150-76-9

## Drug Levels and Effects

### Summary of Use during Lactation

The excretion of octreotide into breastmilk has not been studied. However, because it has a high molecular weight of 1019 daltons it is likely to be poorly excreted into breastmilk. It is poorly absorbed orally and has been safely administered directly to infants by injection, so it is unlikely to adversely affect the breastfed infant.[1] At least 3 infants have been successfully breastfed with no adverse effects reported. Until more data are available, octreotide should be used in nursing mothers with careful infant monitoring, especially if the infant is under 2 months of age.

### Drug Levels

Maternal Levels. A woman with acromegaly became pregnant while taking octreotide. During pregnancy she increased her dose to octreotide doses up to 100 mcg injected every 1 to 2 hours (1200 to 2400 mcg/daily) to keep herself free from headaches. The concentration of octreotide in her colostrum was 4.6 mcg/L. The dose at the time of sampling and exact timing of the sample were not provided.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with acromegaly took long-acting octreotide (Sandostatin LAR; dose not stated) every 6 weeks postpartum while breastfeeding. At 6 months postpartum, the frequency of the injections was increased to every 4 weeks. She breastfed her infant (extent not stated) for 12 months. At age 5 years the child had developed normally.[3]

### Effects on Lactation and Breastmilk

A woman with acromegaly received octreotide 900 to 1200 mg daily divided in multiple administration doses during pregnancy and continued postpartum (dose not stated). She breast-fed her baby for 4 months with no apparent problem. One mother was treated for acromegaly during pregnancy and postpartum with octreotide She breastfed (extent not stated) her infant for 4 months with no apparent problem.[4]

A pregnant woman with acromegaly started long-acting octreotide (LAR) 10 mg monthly at 12 weeks gestation. After delivery, she breastfed her until 6 weeks postpartum when she required an increase in octreotide LAR to 20 mg monthly. She continued to breastfeed successfully on octreotide.[5]

Two women with acromegaly were treated with depot octreotide 20 mg monthly during pregnancy and postpartum. One successfully breastfed for 4 months and the other for 6 months.[6]

### References

1 van der Steen I, van Albada ME, Mohnike K, . A multicenter experience with long-acting somatostatin analogues in patients with congenital hyperinsulinism. Horm Res Paediatr 2018;89:82-9.29241206
2 Maffei P, Tamagno G, Nardelli GB, . Effects of octreotide exposure during pregnancy in acromegaly. Clin Endocrinol (Oxf) 2010;72:668-77.19769624
3 Babińska A, Olszewska H, Sworczak K. Safe treatment with somatostatin analogues in a woman with acromegaly whilst pregnant and lactating [and personal comunication with the author]. Neuro Endocrinol Lett 2021;42:433-7.34969186
4 Colao A, Merola B, Ferone D, . Acromegaly. J Clin Endocrinol Metab 1997;82:2777-81.9284694
5 Assal A, Malcolm J, Lochnan H, . Preconception counselling for women with acromegaly: More questions than answers. Obstet Med 2016;9:9-14.27512484
6 Das L, Dutta P, Thirunavukkarasu B, . Course and outcomes of pregnancy in women treated for acromegaly: Discerning a contemporary cohort. Growth Horm IGF Res 2021;60-61:101417.34271296

## Substance Identification

### Substance Name

Octreotide

### CAS Registry Number

83150-76-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents, Hormonal

Gastrointestinal Agents